# Clomipramine

CASRN: 303-49-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited evidence indicates that use of clomipramine during breastfeeding is acceptable. For women who were taking clomipramine during pregnancy, the amount of drug in breastmilk may be insufficient to prevent neonatal withdrawal symptoms in breastfed infants. A safety scoring system finds clomipramine to be possibly used with caution during breastfeeding.[1] For use as an antidepressant, clomipramine may be less desirable than other antidepressants that have been studied more thoroughly.

### Drug Levels

Maternal Levels. One woman took a dose of 125 mg of clomipramine daily during pregnancy and for 7 days postpartum, then increased to 150 mg daily. Milk levels taken 10 to 14 hours after the 125 mg dose on days 4 and 6 were 343 and 216 mcg/L, respectively. Milk levels taken 10 to 14 hours after the 150 mg dose on days 10, 14 and 35 were 270, 305 and 624 mcg/L, respectively. Using the average of the above concentrations, a fully breastfed infant would receive about 2.2% of the maternal weight-adjusted dosage of clomipramine in breastmilk.[2]

In a study of 2 mothers, concentrations of clomipramine were measured in the milk 12 to 15 hours after the dose. In one who was taking 100 mg daily, the level in foremilk was 60 mcg/L and in hindmilk was 226 mcg/L. The other woman was taking 75, 100 and then 125 mg daily. Three measurements of milk clomipramine on the 125 mg dose averaged 148 mcg/L (range 98 to 212 mcg/L) in foremilk and 202 mcg/L (range 136 to 250 mcg/L) in hindmilk. Using the average of the above fore- and hindmilk concentrations, a fully breastfed infant would receive about 1.3% of the maternal weight-adjusted dosage of clomipramine in breastmilk.[3]

A woman was treated with clomipramine 25 mg daily during pregnancy and postpartum. At 33 days postpartum, a breastmilk sample taken 12 to 15 hours after the dose contained clomipramine in a concentration of 55.1 mcg/L. Desmethylclomipramine concentration was undetectable (<50 mcg/L) in breastmilk.[4]

Infant Levels. An infant was born with a serum clomipramine level of 267 mcg/L because of transplacental passage. Breastfeeding was instituted on day 7 postpartum during maternal use of clomipramine 150 mg daily. Infant serum clomipramine levels 10 to 14 hours after the mother's dose on days 10, 14 and 35 were 45, 24 and 10 mcg/L, respectively.[2]

Two infants whose mothers were taking clomipramine from 1 and 3 weeks postpartum had plasma levels of clomipramine and its major active metabolites obtained at unspecified ages. The drugs were undetectable (< 0.1 mcg/L) in the plasma of an infant whose mother was taking 100 mg daily. In the infant whose mother was taking 75, 100 and then 125 mg daily, the infant had a combined drug and metabolite plasma level of 3.2 mcg/L with a maternal dosage of 75 mg daily. The infant plasma level was 5.5 mcg/L in one instance on a dose of 125 mg daily and undetectable in 3 instances with maternal dosages of 100, 125 and 125 mg daily.[3]

A newborn infant was exclusively breastfed by his mother who was taking clomipramine 25 mg daily. Infant serum obtained 12 to 15 hours after the mother's last dose contained undetectable (<50 mcg/L) amounts of clomipramine and its metabolite, desmethylclomipramine.[4]

Infant serum levels were measured in 4 breastfed infants (one fully breastfed; extent not stated in the other 3) aged 2, 3, 18 and 19 weeks during maternal use of clomipramine 75 to 125 mg daily. Infant serum levels 10 to 12 hours after the maternal dose were undetectable (<10 mcg/L) for clomipramine and its 3 main active metabolites.[5]

### Effects in Breastfed Infants

Follow-up for 1 to 3 years in a group of 20 breastfed infants whose mothers were taking various tricyclic antidepressants found no adverse effects on growth and development. One of the mothers whose infant was followed up at 24 months of age was taking clomipramine 175 mg daily.[6] Two small controlled studies indicate that other tricyclic antidepressants have no adverse effect on infant development.[3,7] In one of the studies, 2 mothers were taking clomipramine 100 mg daily in one and 75 to 125 mg daily in the other.[3]

In another study, 25 infants whose mothers took a tricyclic antidepressant during pregnancy and lactation were tested formally between 15 to 71 months and found to have normal growth and development. Some of the mothers were taking clomipramine.[8]

An infant was born to a mother who had taken clomipramine 25 mg daily during pregnancy. The infant exhibited inadaptation syndrome for the first few days of life. However, the infant was exclusively breastfed while the mother continued clomipramine at the same dose postpartum. At 33 days of life, the infant exhibited no clinical signs of clomipramine side effects.[4]

In an observational case series of 10 infants whose mothers were taking clomipramine in daily dosages ranging from 37.5 to 125 mg daily throughout pregnancy, all infants exhibited withdrawal symptoms after birth. Five of the 10 infants were breastfed, but no difference in withdrawal symptoms was seen between breastfed and non-breastfed infants. In 5 of the infants, 4 of whom were breastfed, the half-life was calculated to average 42 hours (range 27 to 68 hours). The half-life in the non-breastfed infant was 35 hours, which was not statistically different from the breastfed infants. The authors attribute the lack of differences in withdrawal and half-life between breastfed and non-breastfed infants to the small amount of drug that is excreted into breastmilk.[9]

### Effects on Lactation and Breastmilk

Clomipramine has caused increased prolactin levels and galactorrhea in nonpregnant, nonnursing patients.[10-13] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[14] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[15] None of the mothers were taking clomipramine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[16]

### Alternate Drugs to Consider

Fluvoxamine, Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
2 Schimmell MS, Zylber Katz E, Shaag Y, et al. (1991). Toxic neonatal effects following maternal clomipramine therapy. J Toxicol Clin Toxicol.
3 Yoshida K, Smith B, Craggs M, et al. (1997). Investigation of pharmacokinetics and possible adverse effects in infants exposed to tricyclic antidepressants in breast-milk. J Affect Disord.
4 Khachman D, Gandia P, Gaillard MA, et al. (2009). Clomipramine in breast milk: A case study. J Pharm Clin.
5 Wisner KL, Perel JM, Foglia JP. (1995). Serum clomipramine and metabolite levels in four nursing mother-infant pairs. J Clin Psychiatry.
6 Misri S, Sivertz K. (1991). Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med.
7 Buist A, Janson H. (1995). Effect of exposure to dothiepin and northiaden in breast milk on child development. Br J Psychiatry.
8 Nulman I, Rovet J, Stewart DE, et al. (2002). Child development following exposure to tricyclic antidepressants or fluoxetine throughout fetal life: A prospective, controlled study. Am J Psychiatry.
9 ter Horst PG, van der Linde S, Smit JP, et al. (2012). Clomipramine concentration and withdrawal symptoms in 10 neonates. Br J Clin Pharmacol.
10 Anand VS. (1985). Clomipramine-induced galactorrhoea and amenorrhoea. Br J Psychiatry.
11 Fowlie S, Burton J. (1987). Hyperprolactinaemia and nonpuerperal lactation associated with clomipramine. Scott Med J.
12 Egberts AC, Meyboom RH, De Koning FH, et al. (1997). Non-puerperal lactation associated with antidepressant drug use. Br J Clin Pharmacol.
13 Baumgartner A, Graf KJ, Kurten I. (1988). Prolactin in patients with major depressive disorder and in healthy subjects. II. Longitudinal study of basal prolactin and post-TRH-stimulated prolactin levels. Biol Psychiatry.
14 Venkatesh KK, Castro VM, Perlis RH, et al. (2017). Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol.
15 Leggett C, Costi L, Morrison JL, et al. (2017). Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact.
16 Grzeskowiak LE, Saha MR, Nordeng H, et al. (2022). Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Clomipramine

### CAS Registry Number

303-49-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Tricyclic